# Tolbutamide

CASRN: 64-77-7

## Drug Levels and Effects

### Summary of Use during Lactation

Tolbutamide is no longer marketed in the United States. It is excreted into breastmilk in small amounts that should cause no harm to the breastfed infant. Monitor breastfed infants for signs of hypoglycemia such as jitteriness, excessive sleepiness, poor feeding, seizures cyanosis, apnea, or hypothermia. If there is concern, monitoring of the breastfed infant's blood glucose is advisable during maternal therapy with hypoglycemic agents.[1,2]

### Drug Levels

Maternal Levels. In 2 women who were 3 days postpartum, milk levels were measured 4 hours after ingestion of a 500 mg dose of tolbutamide. Milk levels averaged 18 mg/L in one and 3 mg/L in the other.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acarbose (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1/), Colesevelam (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM516/), Glipizide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM127/), Glyburide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM128/), Insulin (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM147/), Metformin (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM173/), Miglitol (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM407/), Semaglutide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/), Tirzepatide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/)

### References

1 Everett JA. Use of oral antidiabetic agents during breastfeeding. J Hum Lact 1997;13:319-21 9429368
2 Berlin CM, Briggs GG. Drugs and chemicals in human milk. Semin Fetal Neonatal Med 2005;10:149-59 15701580
3 Moiel RH, Ryan JR. Tolbutamide orinase in human breast milk. Clin Pediatr (Phila) 1967;6:480 6029660

## Substance Identification

### Substance Name

Tolbutamide

### CAS Registry Number

64-77-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypoglycemic Agents

Sulfonylurea Compounds